# LactMed Selected References

This list contains recent references on drugs and breastfeeding by the LactMed author and colleagues, and the American Academy of Pediatrics.

## OVERVIEWS

Anderson PO. (2018). Drugs in lactation. Pharm Res.
Anderson PO. (2017). Medication information sources for breastfeeding mothers. Breastfeed Med.
Anderson PO. (2017). Choosing medication alternatives during breastfeeding, avoiding alternative facts. Breastfeed Med.
Wang J, Johnson T, Sahin L, Tassinari MS, Anderson PO, Baker TE, Bucci-Rechtweg C, et al. (2017). Evaluation of the safety of drugs and biological products used during lactation: Workshop summary. Clin Pharmacol Ther.
Anderson PO. (2017). The pregnancy-breastfeeding interface. Breastfeed Med.
Anderson PO. (2016). Adverse drug reactions. Breastfeed Med.
Anderson PO. (2016). What do all the numbers mean?. Breastfeed Med.
Anderson PO, Sauberan JM. (2016). Modeling drug passage into human milk. Clin Pharmacol Ther.
Anderson PO. (2016). LactMed update--an introduction. Breastfeed Med.
Anderson PO, Manoguerra AS, Valdés V. (2016). A review of adverse reactions in infants from medications in breastmilk. Clin Pediatr.
Anderson PO, Valdés V. (2015). Variation of milk intake over time: clinical and pharmacokinetic implications. Breastfeed Med.

## OVERVIEWS FROM THE AMERICAN ACADEMY OF PEDIATRICS

Sachs HC, Committee on Drugs. (2013). The transfer of drugs and therapeutics into human breast milk: an update on selected topics. Pediatrics.
Section on Breastfeeding. (2012). Breastfeeding and the use of human milk. Pediatrics.

## SPECIFIC DRUG TOPICS FROM LACTMED

Anderson PO. Breastfeeding in the multiple sclerosis patient. Breastfeed Med 2019. http://www.ncbi.nlm.nih.gov/pubmed/31210538
Sauberan JB. (2019). High-dose vitamins. Breastfeed Med.
Anderson PO. (2019). Maternal vaccination and breastfeeding. Breastfeed Med.
Anderson PO. (2019). A guide to treating irritable bowel syndrome while breastfeeding. Breastfeed Med.
Anderson PO. (2019). When the heart is not in it: Breastfeeding with cardiovascular disease. Breastfeed Med.
Anderson PO. (2018). How sweet it is: Sweeteners in breast milk. Breastfeed Med.
Anderson PO. (2018). Potentially toxic foods while breastfeeding: Garlic, caffeine, mushrooms, and more. Breastfeed Med.
Anderson PO. (2018). Drug treatment of rheumatoid arthritis during breastfeeding. Breastfeed Med.
Anderson PO. (2018). Treating gastroesophageal reflux and heartburn while breastfeeding. Breastfeed Med.
Anderson PO. (2018). Drugs of abuse during breastfeeding. Breastfeed Med.
Anderson PO. (2018). Alcohol use during breastfeeding. Breastfeed Med.
Anderson PO. (2018). Treating diabetes during breastfeeding. Breastfeed Med.
Anderson PO. (2018). Unusual milk colors. Breastfeed Med.
Anderson PO. (2018). Treating hypertension during breastfeeding. Breastfeed Med.
Anderson PO. (2018). Topical drugs in nursing mothers. Breastfeed Med.
Anderson PO. (2017). Cannabis and breastfeeding. Breastfeed Med.
Anderson PO. (2017). Herbal use during breastfeeding. Breastfeed Med.
Anderson PO. (2017). Domperidone: the forbidden fruit. Breastfeed Med.
Anderson PO. (2017). Anticoagulants and breastfeeding. Breastfeed Med.
Anderson PO. (2016). Drugs for hepatitis. Breastfeed Med.
Anderson PO. (2016). Radiopharmaceuticals. Breastfeed Med.
Anderson PO. (2016). Cancer chemotherapy. Breastfeed Med.
Anderson PO. (2016). Monoclonal antibodies. Breastfeed Med.
Anderson PO. (2018). Treating hypertension during breastfeeding. Breastfeed Med.
Anderson PO. (2018). Topical drugs in nursing mothers. Breastfeed Med.
Anderson PO. (2017). Drugs that suppress lactation, part 1. Breastfeed Med.
Anderson PO. (2017). Drugs that suppress lactation, part 2. Breastfeed Med.
Anderson PO. (2016). New and unusual LactMed topics. Breastfeed Med.